# Cyclophosphamide

CASRN: 50-18-0

## Drug Levels and Effects

### Summary of Use during Lactation

Cyclophosphamide appears in milk in potentially toxic amounts; additionally, highly toxic active metabolites could add to the risk to the infant. Neutropenia has been reported in 2 infants whose mothers breastfed them while receiving cyclophosphamide. Most sources consider breastfeeding to be contraindicated during maternal cytotoxic antineoplastic drug therapy, especially alkylating agents such as cyclophosphamide.[1] Although some authors have suggested withholding breastfeeding for 1 to 3 days after a dose,[2] the manufacturer recommends waiting for 1 week after the last dose before resuming breastfeeding.

Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[3] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant.

### Drug Levels

Maternal Levels. Unmetabolized cyclophosphamide was qualitatively detected in milk 1, 3, 5 and 6 hours after IV injection of 500 mg of drug in one patient.[4,5] Quantitative determination was not reported.

A mother who had been exclusively breastfeeding for 6 months was diagnosed with multiple sclerosis. In preparation for stem cell transplantation, she received intravenous cyclophosphamide 2.8 grams daily for 4 consecutive days. She was also receiving anti-thymocyte immune globulin, methylprednisolone, mesna, and furosemide. She provided milk samples several times on each of the 4 days for analysis of cyclophosphamide. No metabolites, including active metabolites, were measured. Peak cyclophosphamide milk levels occurred at 4 to 5 hours each day. However, the level of exposure was lower on each successive day, presumably because of autoinduction of the drug's metabolism. Peak level ranged from 40.8 mg/L on day 1 to 13.2 mg/L on day 4; the average level ranged from 15.1 mg/L on day 1 to 3.1 mg/L on day 4; and the estimated daily infant dosage ranged from 2.3 mg/kg on day 1 to 0.5 mg/kg on day 4. The weight-adjusted percentage of the maternal dosage ranged from 4.8% on day 1 to 0.9% on day 4.[6]

A woman was diagnosed with B-cell non-Hodgkins lymphoma at 4 months postpartum. She received R-CHOP therapy every 21 days for 6 cycles. It consisted of rituximab 375 mg/sq. m, cyclophosphamide 750 mg/sq. m, doxorubicin 50 mg/sq. m, vincristine 1.4 mg/sq. m (capped at 2 mg) plus prednisone 40 mg/sq. m daily. She also received oral 300 mg of allopurinol daily during the whole therapy course. Milk samples were collected twice daily during the first 3 cycles then once daily for the remaining cycles for a total of 290 samples. Cyclophosphamide was detectable in milk shortly after administration, with the peak milk level of over 1 mg/L occurring shortly after the first dose. The toxic metabolites,4-ketocyclophosphamide, 4-hydroxycyclophosphamide, carboxycyclophosphamide, and N-dechloroethylcyclophosphamide were also detectable in milk. Cyclophosphamide dropped to low levels after a week, but the drug and some of its toxic metabolites were still detectable at 21 days after the dose.[7]

A woman with breast cancer diagnosed during pregnancy received chemotherapy beginning a few days after delivery. It consisted of doxorubicin 118 mg and cyclophosphamide 1180 mg every 2 weeks for 4 cycles, followed by paclitaxel 156 mg weekly and carboplatin 900 mg every 4 weeks. She collected 97 milk samples. A second patient was diagnosed with breast cancer 6.5 months postpartum. Her treatment consisted of doxorubicin 130 mg and cyclophosphamide 1300 mg every 2 weeks for 4 cycles, followed by paclitaxel weekly and carboplatin every 4 weeks. She collected 15 milk samples. A selection of 30 samples from the two patients were analyzed for cyclophosphamide. Peak milk levels after the first round of chemotherapy were about 15.5 mg/L in the first patient and about 18 mg/L in the second. Levels decreased to less than 200 mcg/L by about 2 days after the dose. The authors calculated the time for the milk concentration to reach a relative infant dosage (RID) level below 1% to be one day; however potentially toxic metabolites were not measured.[2] A further pharmacokinetic analysis of all breastmilk samples found that cyclophosphamide levels in milk decrease rapidly and that milk should be discarded for 1 to 2 days after each dose in a cycle to achieve a cumulative relative infant dosage of <1%. However, this estimate did not include the presence of active metabolite(s) in milk, so this time represents the minimum time to withhold breastfeeding.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In one 23-day-old infant, neutropenia, thrombocytopenia and a low hemoglobin were possibly caused by cyclophosphamide after 3 days of maternal treatment with cyclophosphamide 6 mg/kg IV daily (total dose 300 mg).[9]

In a 4-month-old, neutropenia was probably caused by cyclophosphamide in a mother 9 days after the last of 6 weekly doses of 800 mg cyclophosphamide intravenously, 2 mg vincristine intravenously and daily doses of 30 mg of prednisolone orally. Neutropenia persisted at least 12 days and was accompanied by a brief episode of diarrhea.[10]

A woman was diagnosed with B-cell lymphoma at 27 weeks of pregnancy. Labor was induced at 34 4/7 weeks and treatment was begun with a standard regimen of rituximab, cyclophosphamide, doxorubicin, vincristine, and prednisone in unspecified doses on a 21-day cycle, starting on day 2 postpartum. She pumped and discarded her milk and fed her infant donor milk for the first 10 days of each cycle and then breastfed her infant for the remaining 10 days before the next treatment cycle. The 10-day period of breastfeeding abstinence was determined by using about 3 half-lives of vincristine. After completion of 4 cycles of chemotherapy, her infant was reportedly healthy and developing without any complications.[11]

### Effects on Lactation and Breastmilk

A case of euprolactinemic galactorrhea was reported in a 55-year-old woman receiving cyclophosphamide for pemphigus vulgaris. One month after starting cyclophosphamide 50 mg daily she experienced fullness in both breasts and bilateral milky nipple discharge. No hormonal abnormalities were found. After cyclophosphamide was discontinued, her symptoms resolved completely and did not recur. Galactorrhea was probably caused by cyclophosphamide.[12]

Telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy, but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 cycles of chemotherapy compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 56 women who received a cyclophosphamide-containing regimen, 34 had breastfeeding difficulties.[13]

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding? Cancer Treat Rev 2013;39:207–11.23199900
2 Damoiseaux D, Calpe S, Rosing H, et al. Presence of 5 chemotherapeutic drugs in breast milk as a guide for the safe use of chemotherapy during breastfeeding: Results from a case series. Clin Pharmacol Ther 2022;112:404–10.35486426
3 Urbaniak C, McMillan A, Angelini M, et al. Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome 2014;2:24.25061513
4 Duncan JH, Colvin OM, Fenselau C. Mass spectrometric study of the distribution of cyclophosphamide in humans. Toxicol Appl Pharmacol 1973;24:317–23.4741053
5 Wiernik PH, Duncan JH. Cyclophosphamide in human milk. Lancet 1971;1:912.4102054
6 Fierro ME, Datta P, Rewers-Felkins K, et al. Cyclophosphamide use in multiple sclerosis: Levels detected in human milk. Breastfeed Med 2019;14:128–30.30589584
7 Codacci-Pisanelli G, Honeywell RJ, Asselin N, et al. Breastfeeding during R-CHOP chemotherapy: Please abstain! Eur J Cancer 2019;119:107–11.31437753
8 Damoiseaux D, Centanni D, Beijnen JH, et al. Predicting chemotherapy distribution into breast milk for breastfeeding women using a population pharmacokinetic approach. Clin Pharmacokinet 2023;62:969–80.37154994
9 Durodola JI. Administration of cyclophosphamide during late pregnancy and early lactation: A case report. J Natl Med Assoc 1979;71:165–6.423292
10 Amato D, Niblett JS. Neutropenia from cyclophosphamide in breast milk. Med J Aust 1977;1:383–4.859486
11 Hersey AE, Giglio P, Kurt H, et al. Diffuse large B-cell lymphoma during third-trimester pregnancy and lactation. Obstet Gynecol 2020;135:383–6.31923071
12 Jangid KM, Tambe SA, Mahobia S, et al. A case of cyclophosphamide-induced euprolactinemic galactorrhea. Indian J Dermatol Venereol Leprol 2024;91:660–1.39152801
13 Stopenski S, Aslam A, Zhang X, et al. After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible? Breastfeed Med 2017;12:91–7.28170295

## Substance Identification

### Substance Name

Cyclophosphamide

### CAS Registry Number

50-18-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Alkylating Agents